# Cascara Sagrada

CASRN: 8047-27-6

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal cascara intake might cause loose stools in some breastfed infants and should be avoided.[1] Other cathartics are preferred.

### Drug Levels

After administration of 65 mg of cascara sagrada as cascara fluidextract, cascara was qualitatively detected in the breastmilk of 5 of 10 women collected over 20 hours.[2] The sensitivity of the assay was about 1100 mg/L of cascara.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In 2 uncontrolled studies, a total of 10 of 22 breastfed neonates appeared to have loose stools after administration of 65 mg of cascara as cascara fluidextract to their mothers.[2]

In an observational case series, no cases of diarrhea were observed among the breastfed infants of 142 mothers who received 400 mg of cascara extract on day 3 postpartum.[3] This result might have been because of the small amount of colostrum received by the infants of this age.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Bisacodyl, Magnesium Hydroxide, Senna

### References

1 Lewis JH, Weingold AB, Committee of FDA-Related Matters American College of Gastroenterology. (1985). The use of gastrointestinal drugs during pregnancy and lactation. Am J Gastroenterol.
2 Tyson RM, Shrader EA, Perlman HH. (1937). Drugs transmitted through breast milk. Part I: Laxatives. J Pediatr.
3 Duncan AS. (1957). Standardized senna as a laxative in the puerperium. A clinical assessment. Br Med J.

## Substance Identification

### Substance Name

Cascara Sagrada

### CAS Registry Number

8047-27-6

### Drug Class

Breast Feeding

Lactation

Cathartics

Gastrointestinal Agents